# Dexamethasone

CASRN: 50-02-2

## Drug Levels and Effects

### Summary of Use during Lactation

Little information is available on the use of systemic dexamethasone during breastfeeding. Short-term use of dexamethasone is unlikely to affect the breastfed infant. An alternate corticosteroid might be preferred for long-tern use. Local injections, such as for tendinitis, are not expected to cause any adverse effects in breastfed infants. Medium to large doses of corticosteroids, including dexamethasone, given systemically or injected into joints or the breast have been reported to cause temporary reduction of lactation. See also Dexamethasone, Topical.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

No adverse reactions have been reported with any corticosteroid.

A retrospective cohort study compared the breastfeeding success among multiparous women with a vaginal delivery who received postpartum epidural analgesia. One group received 0.15% ropivacaine for analgesia and the other group received 0.15% ropivacaine plus 10 mg of dexamethasone. The epidural was continued for 48 hours. There were no significant differences in 1-minute Apgar scores, 5-minute Apgar scores, neonatal jaundice, hypoglycemia, or infection rates nor on neonatal hospital stay duration or neonatal intensive care unit admission rates.[1]

### Effects on Lactation and Breastmilk

Dexamethasone can cause a decrease in basal serum prolactin and thyrotropin-releasing hormone stimulated serum prolactin increase in nonnursing women.[2,3] Medium to large doses of corticosteroids given systemically or injected into joints or the breast have been reported to cause temporary reduction of lactation.[4-8]

A study of 46 women who delivered an infant before 34 weeks of gestation found that a course of another corticosteroid (betamethasone, 2 intramuscular injections of 11.4 mg of betamethasone 24 hours apart) given between 3 and 9 days before delivery resulted in delayed lactogenesis II and lower average milk volumes during the 10 days after delivery. Milk volume was not affected if the infant was delivered less than 3 days or more than 10 days after the mother received the corticosteroid.[9] An equivalent dosage regimen of dexamethasone might have the same effect.

A study of 87 pregnant women found that betamethasone given as above during pregnancy caused a premature stimulation of lactose secretion during pregnancy. Although the increase was statistically significant, the clinical importance appears to be minimal.[10] An equivalent dosage regimen of dexamethasone might have the same effect.

A woman with postpartum depression who was breastfeeding her 8-week-old infant was treated with endovascular embolization for a spinal-dural arteriovenous fistula. Following the procedure, she was treated with intravenous dexamethasone 4 mg every 8 hours for 5 days, followed by oral dexamethasone 12 mg daily in a tapering regimen. After stopping breastfeeding for 3 days after the procedure, she noted a decreased milk supply on restarting breastfeeding, and a complete cessation of milk production 11 days after the procedure. Several measures to increase milk supply, including domperidone, failed. Breastmilk production resumed 36 hours after discontinuing dexamethasone and reached normal production after 8 days. At hospital discharge, she was exclusively nursing her infant.[7]

A retrospective cohort study compared the breastfeeding success among multiparous women with a vaginal delivery who received postpartum epidural analgesia. One group received 0.15% ropivacaine for analgesia and the other group received 0.15% ropivacaine plus 10 mg of dexamethasone. The epidural was continued for 48 hours. At 24 hours postpartum, the dexamethasone group had lower blood levels of TNF-α, IL-6, and C-reactive protein, and higher levels of IL-10. The time to first breastfeeding was shorter in the dexamethasone group (38 vs. 52 minutes). The dexamethasone group also had a higher breastfeeding rate within 48 hours postpartum and a higher exclusive breastfeeding rate on day 7 postpartum. No differences in maternal adverse effects were seen.[1]

A study compared the use of intravenous dexamethasone 25 mg after birth and 24 hours later to dexamethasone 5 mg after birth and placebo 24 hours later following cesarean section for pain control. Seventy-two of 105 mothers in each group breastfed their infants, with no difference in Bristol breastfeeding assessment tool scores over the first 4 days postpartum.[11]

### Alternate Drugs to Consider

(Systemic) Methylprednisolone, Prednisolone, Prednisone

### References

1 Ye H, Wang X, Zhou D, et al. Effect of ropivacaine-dexamethasone combination on postpartum uterine pain, inflammation, and breastfeeding in multiparous women. Am J Transl Res 2026;18:2862–81.42170484
2 Hubina E, Nagy GM, Toth BE, et al. Dexamethasone and adrenocorticotropin suppress prolactin secretion in humans. Endocrine 2002;18:215–9.12450312
3 la Marca A, Torricelli M, Morgante G, et al. Effects of dexamethasone and dexamethasone plus naltrexone on pituitary response to GnRH and TRH in normal women. Horm Res 1999;51:85–90.10352398
4 McGuire E. Sudden loss of milk supply following high-dose triamcinolone (Kenacort) injection. Breastfeed Rev 2012;20:32–4.22724311
5 Babwah TJ, Nunes P, Maharaj RG. An unexpected temporary suppression of lactation after a local corticosteroid injection for tenosynovitis. Eur J Gen Pract 2013;19:248–50.24261425
6 Smuin DM, Seidenberg PH, Sirlin EA, et al. Rare adverse events associated with corticosteroid injections: A case series and literature review. Curr Sports Med Rep 2016;15:171–6.27172081
7 Das N, Dave S, Dangaich R, et al. Lactation failure following therapeutic steroid treatment in a mother with postpartum depression and spinal-dural arteriovenous fistula: Case report and literature review. Int J Gynaecol Obstet 2024;165:389–91.38093554
8 Rosen-Carole C, Datta P, Palmiter K, et al. Transfer of injected triamcinolone into human milk of a lactating patient suffering from idiopathic granulomatous mastitis. Breastfeed Med 2023;18:74–7.36638194
9 Henderson JJ, Hartmann PE, Newnham JP, et al. Effect of preterm birth and antenatal corticosteroid treatment on lactogenesis II in women. Pediatrics 2008;121:e92–100.18166549
10 Henderson JJ, Newnham JP, Simmer K, et al. Effects of antenatal corticosteroids on urinary markers of the initiation of lactation in pregnant women. Breastfeed Med 2009;4:201–6.19772378
11 Roofthooft E, De Loecker C, D'Hoore F, et al. High-dose versus low-dose dexamethasone for postoperative analgesia after Caesarean delivery: a randomised, double-blind, two-centre trial. Br J Anaesth 2026;136:1885–93. doi:10.1016/j.bja.2026.02.005

## Substance Identification

### Substance Name

Dexamethasone

### CAS Registry Number

50-02-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Corticosteroids, Systemic

Glucocorticoids

Anti-Inflammatory Agents